# Triamterene

CASRN: 396-01-0

## Drug Levels and Effects

### Summary of Use during Lactation

Because there is no published experience with triamterene during breastfeeding, other agents may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Intense diuresis can suppress lactation;[1-4] however, it is unlikely that triamterene alone is sufficiently potent to cause this effect.

### Alternate Drugs to Consider

Spironolactone

### References

1 Healy M. Suppressing lactation with oral diuretics. Lancet 1961;1:1353-4. doi:10.1016/S0140-6736(61)90289-6 4134342
2 Reiher KH. Suppression of lactation by stimulation of diuresis. Zentralbl Gynakol 1963;85:188-90.13973786
3 Stout G. Suppression of lactation. Br Med J 1962;1:1150.18117911
4 Cominos DC, Van Der Walt A, Van Rooyen AJ. Suppression of postpartum lactation with furosemide. S Afr Med J 1976;50:251-2.3858

## Substance Identification

### Substance Name

Triamterene

### CAS Registry Number

396-01-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Diuretics